# Sulindac

CASRN: 38194-50-2

## Drug Levels and Effects

### Summary of Use during Lactation

Because no information is available on the use of sulindac during breastfeeding, its relatively long half-life and glucuronide metabolite, other agents are preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Acetaminophen, Celecoxib, Diclofenac, Flurbiprofen, Ibuprofen, Indomethacin, Naproxen, Piroxicam

## Substance Identification

### Substance Name

Sulindac

### CAS Registry Number

38194-50-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Analgesic Agents

Anti-inflammatory Agents. Nonsteroidal